# Benzalkonium Chloride

CASRN: 8001-54-5

## Drug Levels and Effects

### Summary of Use during Lactation

Topical maternal application of benzalkonium chloride or benzethonium chloride or their presence as a preservative in pharmaceuticals would not be expected to cause any adverse effects in breastfed infants. Household disinfecting sprays and wipes contribute to the benzalkonium chloride content of milk. The effects of long-term exposure of the infant to low levels in milk is not known.

### Drug Levels

Maternal Levels. Four women using tampons containing benzalkonium chloride 60 mg provided breast milk samples 15 min prior to tampon application and 3 and 24 h after application. Benzalkonium chloride was not detected in the blood or breastmilk in any of the four subjects using HPLC analysis (assay limit not stated).[1]

A study of 48 women in the Seattle, Washington area ranging in age from 24 to 42 years of age who were breastfeeding their first child manually extracted milk samples for analysis. Milk samples were collected prior to the COVID-19 pandemic. Ninety milk samples containing benzalkonium compounds with alkyl chain lengths ranging from C10 to C18 had a mean total benzalkonium concentration of 1.2 mcg/L. Quaternary ammonium compounds (QACs, including alkyltrimethyl ammonium compounds) were found in breastmilk with at least one QAC found in each sample and 7 QACs detected in more than half of the samples. The highest concentrations of benzalkonium chloride components were of C12 at 0.51 mcg/L and C14 at 0.56 mcg/L. Higher QAC levels in breastmilk were found in mothers who used QAC-containing disinfecting products (especially sprays) and disinfected more often. The authors estimated that fully breastfed infants would receive average daily benzalkonium chloride intake of 138 ng/kg under 1 month of age, 128 ng/kg from 1 to 3 months of age, 102 ng/kg from 3 to 6 months of age and 77 ng/kg between 6 and 12 months of age (nonexclusive breastfeeding), based on variations in milk intake during each time period.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study in Japan randomized 80 consecutive term patients into 4 groups who received either povidone-iodine or benzethonium chloride as a skin disinfectant before delivery and one of these for postpartum vaginal lacerations. Prepartum doses were about 7 mL and postpartum doses were about 0.5 mL of solution. Infant thyrotropin levels were elevated in the infants whose mothers received topical povidone-iodine pre- and postpartum compared to infants whose mothers received benzethonium chloride.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Chlorhexidine

### References

1 Johnson W. (1989). Final report on the safety assessment of benzalkonium chloride. J Am Coll Toxicol.
2 Zheng G, Schreder E, Sathyanarayana S, et al. (2022). The first detection of quaternary ammonium compounds in breast milk: Implications for early-life exposure. J Expo Sci Environ Epidemiol.
3 Koga Y, Sano H, Kikukawa Y, et al. (1995). Affect on neonatal thyroid function of povidone-iodine used on mothers during perinatal period. J Obstet Gynaecol (Tokyo).

## Substance Identification

### Substance Name

Benzalkonium Chloride

### CAS Registry Number

8001-54-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Local

Antibacterial Agents

Detergents

Preservatives, Pharmaceutical